# Estradiol

CASRN: 50-28-2

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information on the use of estradiol during breastfeeding indicates that the route of administration and dosage form have influences on the amount transferred into breastmilk. Vaginal administration results in measurable amounts in milk, but transdermal patches do not. Maternal doses of up to 200 mcg daily transdermally do not increase estradiol or estriol in breastfed infants or cause any adverse effects in breastfed infants. Vaginal administration results in unpredictable peak times for estradiol in breastmilk, so timing of the dose with respect to breastfeeding is probably not useful. Milk estradiol levels have not been studied after use of the estradiol gel, but maternal blood levels only increase slightly in a dose-dependent manner.

Estrogens can decrease the milk supply, especially if started before the milk supply is well established at about 6 weeks postpartum. The decrease can happen over the first few days of estrogen exposure.[1] A case report of inadequate milk production and inadequate infant weight gain was possibly caused by transdermal estradiol initiated on the first day postpartum, but 2 small studies found no such effect when the drug was initiated after lactation was well established. Low dose estradiol vaginal cream used twice weekly did not interfere with milk production in one study.

### Drug Levels

Maternal Levels. Six women who were 6 or more months postpartum were given a vaginal suppository containing 50 or 100 mg of estradiol. In 3 of the 6 women, peak milk levels occurred 3 hours after the dose. In 2 others, the peak level occurred 7 hours after the dose and in the sixth, the peak occurred 11 hours after the dose. Peak milk levels were about 100 ng/L in 4 women, in one it was 300 ng/L and in the sixth, it was 1000 ng/L.[2]

Twenty-one women who were 20 weeks postpartum and breastfeeding their infants were randomized to receive a transdermal patch that released estradiol 50 mcg (n = 7), 75 mcg (n = 5) or 100 mcg (n = 6) daily or placebo (n = 4) for 2 weeks. Breastmilk and serum samples were collected at the beginning and end of the study. Serum estradiol levels increased slightly from baseline, but the differences were not statistically significant; serum levels were in the range of 25 to 45 ng/L. Estradiol was undetectable (<6.8 ng/L) in all breastmilk samples.[3]

Infant Levels. Six nursing mothers received transdermal estradiol as part of a study comparing estradiol to sertraline and placebo for postpartum depression. The mothers received estradiol dosages between 50 and 200 mcg daily (mean 133 mcg daily) at the time of serum level analysis at 4 and 8 weeks of therapy. Four of the 6 infants were exclusively breastfed and the other two were more than 50% breastfed. All infants had undetectable (<2.5 ng/L) serum estriol concentrations and 4 of the 6 had undetectable (<2.5 ng/L) serum estradiol concentrations. The other two had estradiol concentrations of 7 and 7.1 ng/L. The serum estriol and estradiol concentrations were not significantly different from breastfed infants in the placebo or sertraline arms of the study. No correlation was found between maternal and infant serum concentrations of estriol or estradiol.[4]

### Effects in Breastfed Infants

A mother who had severe postpartum depression with 2 previous infants was prescribed a transdermal estradiol patch that released 50 mcg daily beginning on day 1 postpartum to prevent recurrence of depression. At 11 days of age, the infant was jaundiced and had gained only 60 grams since birth. With more frequent nursing, weight gain improved, but remained inadequate until day 28 when the estradiol was discontinued. The infant then experienced above average weight gain through day 66 postpartum. The delayed and reduced weight gain was possibly caused by estradiol.[5]

Six nursing mothers received transdermal estradiol as part of a study comparing estradiol to sertraline and placebo for postpartum depression. The mothers received estradiol dosages between 50 and 200 mcg daily (mean 133 mcg daily) at the time of serum level analysis at 4 and 8 weeks of therapy. Four of the 6 infants were exclusively breastfed and the other two were more than 50% breastfed. There was no difference in infant length, weight, and head circumference nor in the average daily gains in any of these parameters between treatments.[4]

A telephone follow-up of 16 women taking short-term high dose estradiol valerate found no adverse effects on appetite or growth in their breastfed infants at a median follow-up age of 13 months. The median age of the infant at the start of therapy was 2 months (range 1.5 to 4 months) and the median daily dose was 2 mg (range 1 to 4 mg).[6]

### Effects on Lactation and Breastmilk

Thirteen women who were 12 weeks postpartum and fully breastfeeding their infants were given a transdermal patch that released 100 mcg of estradiol daily. The average number of breast feeds per day did not change significantly during 3 days of patch application.[7]

Nineteen women who were 6 weeks postpartum, using a barrier contraceptive method and breastfeeding their infants were randomized to transdermal patches that released estradiol 50 mcg daily or placebo patches for 12 weeks. An additional control group received no patches. The number of breast feeds per day decreased in all groups over the course of the study, but there were no important differences among the groups.[8]

A retrospective cohort study compared 371 women who received high-dose estrogen (either 3 mg of diethylstilbestrol or 150 mcg of ethinyl estradiol daily) during adolescence for adult height reduction to 409 women who did not receive estrogen. No difference in breastfeeding duration was found between the two groups, indicating that high-dose estrogen during adolescence has no effect on later breastfeeding.[9]

A transgender woman took and spironolactone 50 mg twice daily to suppress testosterone, domperidone 10 mg three times daily, increasing to 20 mg four times daily, oral micronized progesterone 200 mg daily and oral estradiol to 8 mg daily and pumped her breasts 6 times daily to induce lactation. After 3 months of treatment, estradiol regimen was changed to a 0.025 mg daily patch, and the progesterone dose was lowered to 100 mg daily. Two weeks later, she began exclusively breastfeeding the newborn of her partner. Breastfeeding was exclusive for 6 weeks, during which the infant’s growth, development and bowel habits were normal. The patient continued to partially breastfeed the infant for at least 6 months.[10]

A double-blind, placebo-controlled study randomized a term women with a vaginal delivery (≥ 37 weeks and 0 days) associated with a second-degree perineal laceration or greater to receive either Mylan, 0.01% estradiol vaginal cream or a placebo cream. Patients used 1 gram of study cream intravaginally twice weekly for 12 weeks. The rates of breastfeeding at 12 weeks postpartum were similar between the groups.[11]

A transgender woman was taking sublingual estradiol 4 mg twice daily, spironolactone 100 mg twice daily and progesterone 200 mg at bedtime for gender-affirming therapy. In order to prepare for the birth of the infant being carried by her partner, sublingual estradiol was increased to 6 mg twice daily and progesterone was increased to 400 mg at bedtime. Domperidone 10 mg twice daily was also started to increase serum prolactin levels and later increased to 20 mg 4 times daily. Before the delivery date, progesterone was stopped, spironolactone was decreased to 100 mg daily and estradiol was changed to 25 mcg per day transdermally. At day 59 postpartum, estradiol was changed to 2 mg per day sublingually and spironolactone was increased to 100 mg twice daily. The patient was able to produce up to 240 mL of milk daily. The patient was able to produce up to 240 mL of milk daily containing typical macronutrient and oligosaccharide levels.[12]

A transgender woman who wished to breastfeed was given estradiol transdermal patch 150 mcg daily and progesterone 100 mg daily by mouth. Later estradiol spray 100 mcg and domperidone 10 mg 4 times daily were added. Domperidone dosage was then doubled to 20 mg 4 times daily and progesterone was doubled to 100 mg twice daily. After further adjustment of estradiol and progesterone dosages, 7 mL of milk was produced with pumping, but 2 weeks after the infant’s birth, lactation induction was discontinued at the patient’s request.[13]

A 50-year-old transgender woman wished to breastfeed her grandchild was taking baseline treatment with estradiol 0.3 mg transdermal patch every 72 hours and micronized progesterone 200 mg oral once daily. To initiate lactation, her estradiol dose was increased to a 0.4 mg transdermal patch every 72 hours and nipple stimulation was initiated. Later the patient’s progesterone was increased to 300 mg daily and metoclopramide oral 10 mg three times daily was initiated. She lactated for a total of two weeks and nursed the four-month-old infant on multiple occasions. Her peak milk production was 30 mL from her larger right breast, and 8 mL from her smaller left breast.[14]

A 50-year-old transgender woman wished to breastfeed the expected infant of her partner. She was given estradiol in dosages increasing from 6 to 8 mg (6 mg oral and 2 mg gel) daily along with progesterone and domperidone to stimulate lactation. Progesterone was discontinued after 123 days of treatment. The patient was able to produce small quantities of milk and was able to directly breastfeed the infant.[15]

Eight women taking estradiol valerate or estradiol hemihydrate in a median daily dose of 2 mg (range 1 to 4 mg) were followed up by telephone. The median time postpartum at the start of therapy was 2 months (range 1.5 to 4 months). The mean breastfeeding duration was 8.5 months. However, 8 of the women experienced a decrease in milk supply and 3 required supplementation with milk production not returning in these three.[6]

### Alternate Drugs to Consider

Ethinyl Estradiol

### References

1 Moses-Kolko EL, Berga SL, Kalro B, . Transdermal estradiol for postpartum depression: A promising treatment option. Clin Obstet Gynecol 2009;52:516-29.19661765
2 Nilsson S, Nygren KG, Johansson ED. Transfer of estradiol to human milk. Am J Obstet Gynecol 1978;132:653-7.717472
3 Perheentupa A, Ruokonen A, Tapanainen JS. Transdermal estradiol treatment suppresses serum gonadotropins during lactation without transfer into breast milk. Fertil Steril 2004;82:903-7.15482766
4 Pinheiro E, Bogen DL, Hoxha D, . Transdermal estradiol treatment during breastfeeding: maternal and infant serum concentrations. Arch Womens Ment Health 2016;19:409-13.25956588
5 Ball DE, Morrison P. Oestrogen transdermal patches for post partum depression in lactating mothers-a case report. Cent Afr J Med 1999;45:68-70.10565065
6 Shalit S, Yehuda S, De-Haan T, . High dose estrogen during breastfeeding-a prospective study. Neurotoxicol Teratol 2025;109 (Suppl 2):25-6. doi:10.1016/j.ntt.2025.107515
7 Illingworth PJ, Seaton JE, McKinlay C, . Low dose transdermal oestradiol suppresses gonadotrophin secretion in breast-feeding women. Hum Reprod 1995;10:1671-7.8582959
8 Perheentupa A, Critchley HO, Illingworth PJ, . Enhanced sensitivity to steroid-negative feedback during breast-feeding: Low-dose estradiol (transdermal estradiol supplementation) suppresses gonadotropins and ovarian activity assessed by inhibin B. J Clin Endocrinol Metab 2000;85:4280-6.11095468
9 Jordan HL, Bruinsma FJ, Thomson RJ, . Adolescent exposure to high-dose estrogen and subsequent effects on lactation. Reprod Toxicol 2007;24:397-402.17531440
10 Reisman T, Goldstein Z. Case report: Induced lactation in a transgender woman. Transgend Health 2018;3:24-6.29372185
11 Smith PE, McLaughlin EM, Pandya LK, . A pilot randomized controlled trial of vaginal estrogen on postpartum atrophy, perineal pain, and sexual function. Int Urogynecol J 2022;33:3383-90.35441854
12 Delgado D, Stellwagen L, McCune S, . Experience of induced lactation in a transgender woman: Analysis of human milk and a suggested protocol. Breastfeed Med 2023;18:888-93.37910800
13 van Amesfoort JE, Van Mello NM, van Genugten R. Lactation induction in a transgender woman: Case report and recommendations for clinical practice. Int Breastfeed J 2024;19:18.38462609
14 Trahair ED, Kokosa S, Weinhold A, . Novel lactation induction protocol for a transgender woman wishing to breastfeed: A case report. Breastfeed Med 2024;19:301-5.38535753
15 Ikebukuro S, Tanaka M, Kaneko M, . Induced lactation in a transgender woman: Case report. Int Breastfeed J 2024;19:66.39300546

## Substance Identification

### Substance Name

Estradiol

### CAS Registry Number

50-28-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Estrogens

Hormones